# Sincalide

CASRN: 25126-32-3

## Drug Levels and Effects

### Summary of Use during Lactation

Sincalide is a synthetic octapeptide analogue of cholecystokinin. Because sincalide has a molecular weight of 1143 Da, the amount in milk is likely to be low and oral absorption by the infant is unlikely because it is probably partially destroyed in the infant's gastrointestinal tract and poorly absorbed orally. The serum half-life of sincalide is less than 2 minutes, indicating that withholding breastfeeding for 10 minutes after a dose should ensure that the infant is not exposed to the drug.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Sincalide

### CAS Registry Number

25126-32-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Gastrointestinal Hormones

Cholecystokinin

Diagnostic Agents